# Rhenium-186 HEDP

CASRN: 140709-07-5

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of rhenium-186 HEDP (rhenium-186 etidronate) as a therapeutic agent. No information is available on the therapeutic use of rhenium HEDP during breastfeeding. Because strontium can substitute for calcium in infant bones, the manufacturer and expert opinion recommend discontinuing breastfeeding before a nursing mother receives rhenium HEDP.[1]

### Drug Levels

Rhenium 186 emits a beta particle with a mean energy of 0.349 MeV and gamma emission with a 0.137 MeV photo peak. Its physical half-life is 3.7 days.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Bodei L, Lam M, Chiesa C, et al. EANM procedure guideline for treatment of refractory metastatic bone pain. Eur J Nucl Med Mol Imaging 2008;35:1934-40.18649080

## Substance Identification

### Substance Name

Rhenium-186 HEDP

### CAS Registry Number

140709-07-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Etidronic Acid